# Paliperidone

CASRN: 144598-75-4

## Drug Levels and Effects

### Summary of Use during Lactation

Although no published data are available for the use of paliperidone during breastfeeding, the manufacturer reported milk levels indicating that an infant would receive about 1% of the maternal weight-adjusted dosage. Paliperidone is the active metabolite of risperidone. Risperidone data indicate that the concentrations of paliperidone (9-hydroxyrisperidone) in breastmilk are low, and amounts ingested by the infant are small. A safety scoring system finds paliperidone possible to use cautiously during breastfeeding,[1] although others do not recommend it.[2] Because there is no published experience with paliperidone during breastfeeding and little long-term follow-up data, other agents may be preferred, especially while nursing a newborn or preterm infant. Because paliperidone is available only as long-acting products, timing of nursing with respect to doses would not be useful. Long-acting injectable formulations may continue to deliver small amounts to breastmilk for many months. Monitor breastfed infants for drowsiness, adequate growth and weight gain, jitteriness, tremors, and abnormal movements.

### Drug Levels

Paliperidone is 9-hydroxyrisperidone, the active metabolite of risperidone and has been measured in milk and plasma after administration of risperidone.

Maternal Levels. The manufacturer reports that the average adult plasma concentration of paliperidone after the maximum dose of 12 mg daily is about 37 mcg/L.[3] Using the average milk-to-plasma ratio of 9-hydroxyrisperidone of 0.3 from 3 reports of risperidone use during breastfeeding,[4-6] the average milk concentration would be expected to be about 11 mcg/L or a dose of 1.7 mcg/kg daily. An exclusively breastfed infant would receive an average of less than 1% of the maternal weight-adjusted dosage with this maternal dosage.

Infant Levels. In 2 breastfed infants (6 weeks and 3.3 months old) whose mothers were taking 2 mg of risperidone twice daily and 1.5 mg daily in 2 divided doses, respectively, risperidone and 9-hydroxyrisperidone were both undetectable (<1 mcg/L) in the serums of the infants.[5]

An infant was breastfed 6 times daily during maternal therapy with risperidone 2 mg once daily. Fifteen hours after the mother's last dose, the infant's plasma levels of risperidone was undetectable and 9-hydroxyrisperidone was 0.1 mcg/L.[6]

### Effects in Breastfed Infants

No published information on paliperidone was found as of the revision date. However, limited data from the use of its parent drug, risperidone, during nursing indicate no short- or long-term adverse effects on the infant.[5-7]

Patients enlisted in the National Pregnancy Registry for Atypical Antipsychotics who were taking a second-generation antipsychotic drug while breastfeeding (n = 576) were compared to control breastfeeding patients who were not treated with a second-generation antipsychotic (n = 818). Of the patients who were taking a second-generation antipsychotic drug, 60.4% were on more than one psychotropic. A review of the pediatric medical records, no adverse effects were noted among infants exposed or not exposed to second-generation antipsychotic monotherapy or to polytherapy.[8] The number of women taking paliperidone was not reported.

### Effects on Lactation and Breastmilk

Paliperidone has caused elevated prolactin serum levels, gynecomastia, and galactorrhea in patients taking the drug.[9-17] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

Patients enlisted in the National Pregnancy Registry for Atypical Antipsychotics who were taking a second-generation antipsychotic drug while breastfeeding (n = 576) were compared to control breastfeeding patients who had primarily diagnoses of major depressive disorder and anxiety disorders, most often treated with SSRI or SNRI antidepressants, but not with a second-generation antipsychotic (n = 818). Among women on a second-generation antipsychotic, 60.4% were on more than one psychotropic compared with 24.4% among women in the control group. Of the women on a second-generation antipsychotic, 59.3% reported “ever breastfeeding” compared to 88.2% of women in the control group. At 3 months postpartum, 23% of women on a second-generation antipsychotic were exclusively breastfeeding compared to 47% of women in the control group.[8] The number of women taking paliperidone was not reported.

A review of the FDA’s FAERS database analyzed 6,195 reports of drug-induced galactorrhea in all patient populations. Paliperidone had the second-highest report count (1,214) of all drugs reported.[18]

A 26-year-old woman with paranoid schizophrenia was started on paliperidone 12 mg daily. Twenty-six days after treatment initiation a satisfactory plasma paliperidone level of 42 mcg/L was achieved (therapeutic range 20 to 60 mcg/L). The patient developed galactorrhea 4 weeks following paliperidone initiation. Two serial prolactin measurements, weeks 4 and 5 weeks after treatment onset revealed persistent elevation of prolactin above the upper limit of normal, at 130 mcg/L (physiological range 5 to 23 mcg /L). Brexpiprazole 1 mg daily was begun to normalize serum prolactin. Three weeks after the introduction of brexpiprazole, a prolactin assay demonstrated a marked reduction in serum prolactin, from 130 to 37 mcg/L and the galactorrhea resolved. One month later the prolactin level remained at 39 mcg/L. The patient’s periods subsequently returned to a regular pattern also.[19]

### Alternate Drugs to Consider

Haloperidol, Olanzapine, Quetiapine, Risperidone

### References

1 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118–e26.30601177
2 Larsen ER, Damkier P, Pedersen LH, et al. Use of psychotropic drugs during pregnancy and breast-feeding. Acta Psychiatr Scand Suppl 2015;445:1–28.26344706
3 Food and Drug Administration Drug approval package. Invega (paliperidone) extended-release tablets. 2006:127. http://www.accessdata.fda.gov/drugsatfda_docs/nda/2006/021999s000_TOC.cfm
4 Hill RC, McIvor RJ, Wojnar-Horton RE, et al. Risperidone distribution and excretion into human milk: Case report and estimated infant exposure during breast-feeding. J Clin Psychopharmacol 2000;20:285–6.10770482
5 Ilett KF, Hackett LP, Kristensen JH, et al. Transfer of risperidone and 9-hydroxyrisperidone into human milk. Ann Pharmacother 2004;38:273–6.14742766
6 Aichhorn W, Stuppaeck C, Whitworth AB. Risperidone and breast-feeding. J Psychopharmacol 2005;19:211–3.15728443
7 Ratnayake T, Libretto SE. No complications with risperidone treatment before and throughout pregnancy and during the nursing period. J Clin Psychiatry 2002;63:76–7.11838633
8 Viguera AC, Vanderkruik R, Gaccione P, et al. Breastfeeding practices among women taking second-generation antipsychotics: Findings from the National Pregnancy Registry for Atypical Antipsychotics. Arch Womens Ment Health 2022;25:511–6.34318375
9 Davidson M, Emsley R, Kramer M, et al. Efficacy, safety and early response of paliperidone extended-release tablets (paliperidone ER): Results of a 6-week, randomized, placebo-controlled study. Schizophr Res 2007;93:117–30.17466492
10 Kane J, Canas F, Kramer M, et al. Treatment of schizophrenia with paliperidone extended-release tablets: A 6-week placebo-controlled trial. Schizophr Res 2007;90:147–61.17092691
11 Marder SR, Kramer M, Ford L, et al. Efficacy and safety of paliperidone extended-release tablets: Results of a 6-week, randomized, placebo-controlled study. Biol Psychiatry 2007;62:1363–70.17601495
12 Macaluso M, Khan AY. A 19-year-old Black woman with psychotic and depressive symptoms. Psychiatr Ann 2008;38:312–4. doi:10.3928/00485713-20080501-02
13 Skopek M, Manoj P. Hyperprolactinaemia during treatment with paliperidone. Australas Psychiatry 2010;18:261–3.20429680
14 Einarson TR, Hemels ME, Nuamah I, et al. An analysis of potentially prolactin-related adverse events and abnormal prolactin values in randomized clinical trials with paliperidone palmitate. Ann Pharmacother 2012;46:1322–30.22947594
15 Ray I, Jones RM. A 30-year-old woman with galactorrhea. CMAJ 2020;192:E397–e8.32392501
16 Savitz A, Lane R, Nuamah I, et al. Long-term safety of paliperidone extended release in adolescents with schizophrenia: An open-label, flexible dose study. J Child Adolesc Psychopharmacol 2015;25:548–57.26218669
17 Lou S, Cui Z, Ou Y, et al. A multidimensional assessment of adverse events associated with paliperidone palmitate: A real-world pharmacovigilance study using the FAERS and JADER databases. BMC Psychiatry 2025;25:52.39833706
18 Liu Y, Hu D, Lu Y, et al. Global large-scale real-world assessment of drug-associated galactorrhea based on FDA adverse drug reaction reports. Pak J Pharm Sci 2026;39:1–9.41482770
19 Humbert-Claude M, Barbé T, Ionescu MC, et al. Brexpiprazole mitigates hyperprolactinaemia induced by paliperidone in a patient with a history of skin reaction to aripiprazole: Case report introducing a new therapeutic approach. BJPsych Open 2026;12:e137.42144793

## Substance Identification

### Substance Name

Paliperidone

### CAS Registry Number

144598-75-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents